# Ziv-Aflibercept

CASRN: 1609655-49-3

## Drug Levels and Effects

### Summary of Use during Lactation

This record refers to the use of ziv-aflibercept for treating cancer. No information is available on the use of ziv-aflibercept during breastfeeding. Because ziv-aflibercept is a large protein molecule with a molecular weight of 115,000, the amount in milk is likely to be very low and absorption is unlikely because it is probably destroyed in the infant's gastrointestinal tract. However, ziv-aflibercept is usually used in combination with other potentially toxic chemotherapy agents and most sources consider breastfeeding to be contraindicated during maternal antineoplastic drug therapy. Intravitreal aflibercept decreased vascular endothelial growth factor in breastmilk in one woman.[1] Since VEGF is present in human milk and is thought to help in maturation of the infant’s gastrointestinal tract, concern has been raised about the maternal use of VEGF inhibitors during breastfeeding. Note that the typical alternative to breastmilk is infant formula, which contains no VEGF.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Juncal VR, Paracha Q, Bamakrid M, et al. (2020). Ranibizumab and aflibercept levels in breast milk after intravitreal injection. Ophthalmology.

## Substance Identification

### Substance Name

Ziv-Aflibercept

### CAS Registry Number

1609655-49-3

### Drug Class

Breast Feeding

Lactation

Antineoplastic Agents

Angiogenesis Inhibitors

Recombinant Fusion Proteins